# Acetazolamide

CASRN: 59-66-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of acetazolamide up to 1000 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants. American, Canadian and French professional guidelines consider carbonic anhydrase inhibitors acceptable in breastfeeding.[1,2]

### Drug Levels

Maternal Levels. A woman who was 6 days postpartum was given a sustained-release acetazolamide (Diamox Sequels) 500 mg twice daily by mouth for increased intraocular pressure. Milk acetazolamide levels ranged from 1.3 to 2.1 mg/L from 1 to 9 hours after the dose. The authors estimated that the infant received a daily dose of 0.6 mg, which was less than 0.7% of the maternal weight-adjusted dosage.[3]

A woman was treated with acetazolamide for pseudotumor cerebri with acetazolamide 500 mg three times daily during pregnancy and postpartum. Her infant was born with metabolic acidosis which resolved in 6 hours after birth and hypochloremia resolved within 24 hours. Breastmilk acetazolamide concentration was 4.2 mg/L in the first 2 days postpartum. A second mother reported in the same paper was also being treated for pseudotumor cerebri with acetazolamide 500 mg three times daily during pregnancy. Her breastmilk contained acetazolamide 4.2 mg/L within 2 to 3 days after delivery.[4]

Infant Levels. A 10-day old breastfed (extent not stated) infant whose mother was taking sustained-release acetazolamide (Diamox Sequels) 500 mg twice daily from day 6 postpartum. The infant's acetazolamide plasma levels were 0.2, 0.6 and 0.2 mg/L at 2, 3.5 and 12 hours after the maternal dose. These levels averaged 1.5% of 3 maternal plasma levels taken on the same day.[3]

### Effects in Breastfed Infants

A breastfed (extent not stated) infant whose mother was taking sustained-release acetazolamide (Diamox Sequels) 500 mg twice daily exhibited no apparent adverse effects related to acetazolamide from day 6 to day 10 postpartum.[3]

A mother who was taking acetazolamide 250 mg orally twice daily as well as using 2 drops of timolol 0.5% eye drops daily and pilocarpine eye drops twice daily delivered a preterm infant at 36 weeks of gestation. The infant began 5 months of exclusive breastfeeding at 6 hours after birth. On day 2, the infant developed electrolyte abnormalities consisting of hypocalcemia, hypomagnesemia, and metabolic acidosis. The infant was treated with oral calcium gluconate and a single dose of intramuscular magnesium sulfate. Despite continued breastfeeding and maternal drug therapy, the infant's mild metabolic acidosis resolved on day 4 of life and the infant was gaining weight normally at 1, 3 and 8 months, but had mild hypotonicity. The authors considered the metabolic effects to be caused by transplacental passage of acetazolamide that resolved despite the infant being breastfed. The infant gained weight adequately during breastfeeding, but had some mild, residual hypertonicity of the lower limbs requiring physical therapy.[5]

Two women were receiving acetazolamide during pregnancy and postpartum for pseudotumor cerebri. Their infants had metabolic acidosis after birth. Both infants resolved their metabolic acidosis despite receiving maternal breastmilk.[4]

### Effects on Lactation and Breastmilk

A randomized, partially blinded trial compared acetazolamide 1 tablet (presumably 250 mg) by mouth daily, diethylstilbestrol 0.5 mg twice daily, placebo once daily and routine care in 243 mothers who wished to not breastfeed. Pain and breast fullness were assessed at least daily by blinded observers. In this dosage, acetazolamide was no more effective than placebo and somewhat less effective than diethylstilbestrol in relieving discomfort.[6]

### References

1 Belkin A, Chen T, DeOliveria AR, et al. A practical guide to the pregnant and breastfeeding patient with glaucoma. Ophthalmol Glaucoma 2020;3:79-89.32672600
2 Blumen-Ohana E, Sellem E. Pregnancy & glaucoma: SFO-SFG recommendations. J Fr Ophtalmol 2020;43:63-6.31813552
3 Söderman P, Hartvig P, Fagerlund C. Acetazolamide excretion into human breast milk. Br J Clin Pharmacol 1984;17:599-600.6733009
4 Ibrahim A, Hussain N. Brief report: Metabolic acidosis in newborn infants following maternal use of acetazolamide during pregnancy. J Neonatal Perinatal Med 2020;13:419-25.31771084
5 Merlob P, Litwin A, Mor N. Possible association between acetazolamide administration during pregnancy and metabolic disorders in the newborn. Eur J Obstet Gynecol Reprod Biol 1990;35:85-8.2311821
6 Bedrosian L, Erzurumlu K, Levine LS. Acetazolamide (Diamox) in the inhibition of postpartum breast engorgement. N Y State J Med 1957;57:3997-8.13493780

## Substance Identification

### Substance Name

Acetazolamide

### CAS Registry Number

59-66-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Antiglaucoma Agents

Carbonic Anhydrase Inhibitors

Diuretics